# Peramivir

CASRN: 330600-85-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because peramivir is poorly absorbed orally, it is not likely to reach the bloodstream of the infant in clinically important amounts. However, because no information is available on the use of peramivir breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Oseltamivir, Zanamivir

## Substance Identification

### Substance Name

Peramivir

### CAS Registry Number

330600-85-6

### Drug Class

- Breast Feeding
- Lactation
- Antiviral Agents
- Neuraminidase Inhibitors